# Terbutaline

CASRN: 23031-25-6

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal use of oral or inhaled terbutaline is unlikely to affect a breastfed infant. The authors of several reviews and expert guidelines agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[1-4] Terbutaline use as a tocolytic agent might decrease the duration of breastfeeding.

### Drug Levels

Maternal Levels. With long-term maternal intake of 2.5 or 5 mg three times daily orally, milk terbutaline levels ranged from 2.5 to 4 mcg/L at various times during the dosing interval. There was little fluctuation of milk levels. The average dose that an exclusively breastfed infant would receive based on these patients is 1.4% (range 0.7 to 2.2%) of the maternal weight-adjusted dose.[5-7]

Infant Levels. Serum levels were undetectable (<0.1 mcg/L) in one 8-week-old exclusively breastfed infant whose mother was taking oral terbutaline 5 mg three times daily.[5,7]

### Effects in Breastfed Infants

Two papers have reported a total of 4 infants aged 3 to 8 weeks who were breastfed during maternal use of oral terbutaline 2.5 or 5 mg three times daily. None of the infants had any signs of sympathetic stimulation and all were developing normally.[6,7] These cases were also summarized in a third publication.[5]

### Effects on Lactation and Breastmilk

A small retrospective survey from Serbia found that mothers who received a beta agonist pharmacologically similar to terbutaline (fenoterol or hexoprenaline) as a tocolytic breastfed for a shorter period of time than those who received no tocolytic (4.5 vs 9.5 months).[8] It is not known if terbutaline has a similar effect.

A study in an Australian hospital compared breastfeeding outcomes in women who received a cesarean section during 2 time periods. During the first time period women did not receive terbutaline before a category one or two cesarean section (n = 423). In the second period, all women receiving a category one or two cesarean section received terbutaline 250 mcg subcutaneously as a tocolytic agent unless there was a contraindication at the time a decision was made to perform a cesarean section (n = 253). The breastfeeding rates at the time of discharge were 95% in the first period and 99% in the second period. The difference was statistically significant.[9]

### References

1 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8 8937369
2 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8 11254828
3 National Heart, Lung, and Blood, Institute, et al. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46
4 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758
5 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91 6586490
6 Boréus LO, de Château P, Lindberg C, et al. Terbutaline in breast milk. Br J Clin Pharmacol 1982;13:731-2 7082542
7 Lönnerholm G, Lindström B. Terbutaline excretion into breast milk. Br J Clin Pharmacol 1982;13:729-30 7082541
8 Bjelakovic L, Trajkovic T, Kocic G, et al. The association of prenatal tocolysis and breastfeeding duration. Breastfeed Med 2016;11:561-3 27704871
9 Buckley VA, Wu J, De Vries B. Outcomes following acute tocolysis prior to emergency caesarean section. Aust N Z J Obstet Gynaecol 2020;60:884-9 32378185

## Substance Identification

### Substance Name

Terbutaline

### CAS Registry Number

23031-25-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bronchodilator Agents

Beta Adrenergic Agonists